# Tasimelteon

CASRN: 609799-22-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of tasmelteon during breastfeeding. Monitor the infant for drowsiness and adequate feeding, especially while nursing a newborn or preterm infant. Until more data become available an alternate drug may be preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zaleplon, Zolpidem

## Substance Identification

### Substance Name

Tasimelteon

### CAS Registry Number

609799-22-6

### Drug Class

Breast Feeding

Lactation

Central Nervous System Depressants